# Propafenone

CASRN: 54063-53-5

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of propafenone up to 900 mg daily produce low levels in milk. If propafenone is required by the mother it is not a reason to discontinue breastfeeding. Until more data become available, propafenone should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. On the third postpartum day, one woman taking propafenone 300 mg orally 3 times daily had milk levels just before the morning dose of 32 and 47 mcg/L of propafenone and hydroxypropafenone, respectively. The authors estimated that a fully breastfed would receive a dose of propafenone and its metabolite of about 0.03% of the mother's weight-adjusted dosage.[1]

One mother (time postpartum not stated) took a single dose of propafenone 150 mg orally. The highest milk propafenone level was 37.4 mcg/L at 2 hours after the dose. By 6 hours after the dose, the drug was undetectable (<10 mcg/L). The highest milk 5-hydroxypropafenone level was 102 mcg/L at 2 hours after the dose. By 6 hours after the dose, the level was 19.8 mcg/L and by 12 hours it was undetectable (<10 mcg/L) in milk. The authors estimated that an exclusively breastfed infant would receive 0.1% of the maternal weight-adjusted dosage of propafenone as drug and metabolite.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Libardoni M, Piovan D, Busato E, et al. Transfer of propafenone and 5-OH-propafenone to foetal plasma and maternal milk. Br J Clin Pharmacol 1991;32:527-8 1958453
2 Wakaumi M, Tsuruoka S, Sakamoto K, et al. Pilsicainide in breast milk from a mother: Comparison with disopyramide and propafenone. Br J Clin Pharmacol 2005;59:120-2 15606453

## Substance Identification

### Substance Name

Propafenone

### CAS Registry Number

54063-53-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiarrhythmics